# Allopurinol

CASRN: 315-30-0

## Drug Levels and Effects

### Summary of Use during Lactation

Limited information indicates that a maternal dose of allopurinol of 300 mg daily provides near-therapeutic dose and plasma levels in an exclusively breastfed infant. The manufacturer recommends avoiding allopurinol during breastfeeding and for one week after the last dose. If the mother requires allopurinol, it is not a reason to discontinue breastfeeding, but exclusively breastfed infants should be monitored if this drug is used, including observation for allergic reactions (such as rash) and periodic CBC and differential blood counts.

### Drug Levels

Allopurinol is metabolized to oxypurinol which has xanthine oxidase inhibitory activity equal to allopurinol's. Oxypurinol is absorbed well from the gastrointestinal tract.

Maternal Levels. A woman who was 5 weeks postpartum had been taking allopurinol 300 mg orally for 4 weeks. Two hours after a dose her breastmilk contained 0.9 mg/L of allopurinol and 53.7 mg/L of its active metabolite oxypurinol. Four hours after the dose, her breastmilk contained 1.4 mg/L of allopurinol and 48 mg/L of oxypurinol. The authors calculated that the exclusively breastfed infant would receive between 0.14 and 0.2 mg/kg of allopurinol and between 7.2 to 8 mg/kg of oxypurinol daily. This dose of oxypurinol is slightly less than the infant allopurinol dose of 10 mg/kg daily.[1,2]

Infant Levels. A 5-week-old infant whose mother had been taking allopurinol 300 mg daily for 4 weeks had plasma levels of allopurinol that was undetectable (<0.5 mg/L) and of oxypurinol that was 6.6 mg/L 2 hours after nursing and 4 hours after the mother's dose of allopurinol. This plasma level was 33 to 48% of the measured maternal plasma oxypurinol levels.[1,2]

### Effects in Breastfed Infants

One infant breastfed from age 1 week to age 7 weeks during maternal allopurinol therapy with 300 mg or allopurinol daily. The infant had no observable side effects and no changes in clinical chemistry and hematology values.[2]

A national survey of gastroenterologists in Australia identified 21 infants who were breastfed by mothers taking a combination of allopurinol and a thiopurine (e.g. azathioprine, mercaptopurine) to treat inflammatory bowel disease. All had taken the combination during pregnancy also. Two postpartum infant deaths occurred, both at 3 months of age. One was a twin (premature birth-related) and the other from SIDS. The authors did not believe the deaths were medication related.[3] No information was provided on the extent of breastfeeding, specific thiopurines, drug dosages or the outcomes of the other infants.

A single-center, retrospective study found 44 women with inflammatory bowel disease who had 62 pregnancies and 59 live births who took low-dose azathioprine in combination with allopurinol during pregnancy and postpartum. Eighty-four percent of their infants were breastfed and no serious signals or complications were reported first year of life.[4]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Probenecid

### References

1 Kamilli I, Gresser U, Schaefer C, et al. Allopurinol in breast milk. Adv Exp Med Biol 1991;309A:143-5.1789194
2 Kamilli I, Gresser U. Allopurinol and oxypurinol in human breast milk. Clin Investig 1993;71:161-4.8461629
3 Beswick L, Shukla D, Friedman AB, et al. National audit: Assessing the use and safety of allopurinol thiopurine co-therapy in pregnant females with inflammatory bowel disease. J Gastroenterol Hepatol 2016;31 (Suppl 2):128-9. doi:10.1111/jgh.13521
4 Sivananthan K, Wildt S, Kiszka-Kanowitz M, et al. Treatment with allopurinol and low-dose azathioprine during pregnancy in patients with Inflammatory Bowel Disease. A Danish single center experience. J Crohns Colitis 2025;19:i1828. doi:10.1093/ecco-jcc/jjae190.1158

## Substance Identification

### Substance Name

Allopurinol

### CAS Registry Number

315-30-0

### Drug Class

Breast Feeding

Lactation

Milk, Human

Antigout Agents

Enzyme Inhibitors

Gout Suppressants